# Emu Oil

## Drug Levels and Effects

### Summary of Use during Lactation

Emu oil is a mixture of fatty acids derived from the fat of the emu (Dromiceius novahollandiae). It contains linoleic, linolenic myristic, oleic, palmitic, palmitoleic, and stearic acids. It has been used as a moisturizing agent and some animal data indicate that in might promote wound healing and decrease inflammation. An emu oil-based cream (Clemulina Pus cream, Sitar Laboratories, Padua, Italy) applied to the nipples and areolas of breastfeeding mothers after each nursing appeared to improve skin hydration. Whether this led to reduced nipple cracking or any effects on nursing infants was not studied.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Aloe, Lanolin, Peppermint

### References

1 Zanardo V, Giarrizzo D, Maiolo L, et al. (2016). Efficacy of topical application of emu oil on areola skin barrier in breastfeeding women. J Evid Based Complementary Altern Med.

## Substance Identification

### Substance Name

Emu Oil

### Scientific Name

Dromiceius novahollandiae

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents, Local

Complementary Therapies

Cosmetics

Oils